# Dupilumab

CASRN: 1190264-60-8

## Drug Levels and Effects

### Summary of Use during Lactation

Evidence indicates that dupilumab is acceptable to use during breastfeeding. Because dupilumab is a large protein molecule with a molecular weight of about 147,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant’s gastrointestinal tract and absorption by the infant is probably minimal.[2] Expert opinions consider dupilumab acceptable during breastfeeding.[3-5] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[6] Until more data become available, dupilumab should be used with caution while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A woman began receiving dupilumab 300 mg subcutaneously every 2 weeks starting 2.5 months after delivery. A milk sample 3 days after a dose had a dupilumab concentration of 1.1 mg/L, which was 1.3% of the simultaneous maternal plasma concentration.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with atopic eczema received dupilumab subcutaneously in a dose of 300 mg every 2 weeks during pregnancy and postpartum. She breastfed her infant (extent not stated) for at least 4 months during which no complications were reported.[8,9] Seven months after delivery, she became pregnant again and continued dupilumab at the same dose throughout the pregnancy and lactation. No complications were seen during breastfeeding.[10]

Eight women with atopic dermatitis received dupilumab during pregnancy and breastfeeding. Two breastfed for 1 month, one for 7.2 months, one for 8.8 months, one for 10 months, one for 11.5 months, one for 14.5 months, and one for 16.1 months. None of the babies had developed atopic dermatitis at the time of publication and no adverse effects were reported.[11]

A woman in Portugal with long-standing atopic dermatitis began dupilumab therapy (dose not stated) with good results. She became pregnant and continued dupilumab. She delivered a healthy infant and breastfed for 8 months (extent not stated). The breastfed infant had no complications.[12]

A woman with long-standing atopic dermatitis began receiving dupilumab 300 mg every 2 weeks. When she became pregnant 24 months later, she stopped the drug, but had a disease flare in 2 weeks. The drug was restarted and she continued receiving it throughout the pregnancy and postpartum. She breastfed (extent and duration not stated) her infant. At 18 months of age, the infant had no complications.[13]

Investigators in Portugal reported a retrospective study of moderate-to-severe atopic dermatitis treated with dupilumab during pregnancy and breastfeeding in three tertiary medical centers. Two women with atopic dermatitis and allergic rhinitis took dupilumab for 9 and 18 months, respectively, while breastfeeding their infants. The exact dosage and extent of breastfeeding were not specified. The infants showed normal development and weight gain.[14]

A woman developed severe pemphigoid gestationis that was treated with corticosteroids during pregnancy. Postpartum she was given dupilumab 600 mg as a loading dose 2 weeks postpartum, followed by 300 mg every 2 weeks for 45 weeks. She breastfed without significant adverse effects to the infant.[15]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, . A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Middleton PG, Gade EJ, Aguilera C, . ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208.31699837
4 Deleuran M, Dézfoulian B, Elberling J, . Systemic anti-inflammatory treatment of atopic dermatitis during conception, pregnancy and breastfeeding: Interdisciplinary expert consensus in Northern Europe. J Eur Acad Dermatol Venereol 2024;38:31-41.37818828
5 Naftel J, Jackson DJ, Coleman M, . An international consensus on the use of asthma biologics in pregnancy. Lancet Respir Med 2024
6 Krysko KM, Dobson R, Alroughani R, . Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350-66.36931808
7 Dekkers C, El Amrani M, van Luin M, . Limited excretion of dupilumab into breastmilk: A case report. J Eur Acad Dermatol Venereol 2023;37:e1154-e5.37143362
8 Kage P, Simon JC, Treudler R. A case of atopic eczema treated safely with dupilumab during pregnancy and lactation. J Eur Acad Dermatol Venereol 2020;34:e256-e7.31990389
9 Treudler R, Kage P, Simon JC. A case of atopic eczema treated safely with dupilumab during pregnancy and lactation Allergy 2020;75 (Suppl. 109):432. doi:10.1111/all.14508
10 Kage P, Simon JC, Treudler R. Case of atopic eczema treated with dupilumab throughout conception, pregnancy, and lactation. J Dermatol 2021;48:E484-5.34342905
11 Escolà H, Figueras-Nart I, Bonfill-Orti M, . Dupilumab for atopic dermatitis during pregnancy and breastfeeding: Clinical experience in 13 patients. J Eur Acad Dermatol Venereol 2023;37:e1156-e60.37143399
12 Alvarenga JM, Maria Lé A, Torres T. Dupilumab for atopic dermatitis during pregnancy and breastfeeding: A case report. Actas Dermo-Sifiliograficas 2024;115:1100-2.37858861
13 Di Lernia V, Peccerillo F. Long-term follow-up of dupilumab treatment during conception, pregnancy and lactation. Indian J Dermatol 2024;69:193-5.38841220
14 Xará J, Farinha P, Lé AM, . Pregnancy and breastfeeding outcome in patients with atopic dermatitis treated with dupilumab: The clinical experience of three centers. Int J Dermatol 2024;63:e335-e7.39090818
15 Soto-Canetti G, Navrazhina K, Talia J. Dupilumab for the treatment of pemphigoid gestationis in the setting of breastfeeding: a case report and review of the literature. Skin Health Dis 2026;6:363-8.42539867

## Substance Identification

### Substance Name

Dupilumab

### CAS Registry Number

1190264-60-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Biological Response Modifiers

Immunologic Adjuvants

Antibodies, Monoclonal